# Adagrasib

CASRN: 2326521-71-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of adagrasib during breastfeeding. Because adagrasib is 98% bound to plasma proteins, the amount in milk is likely to be low. However, because of its potential toxicity in the breastfed infant and its half-life of 23 hours, the manufacturer recommends that breastfeeding be discontinued during adagrasib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Adagrasib

### CAS Registry Number

2326521-71-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents